# Cenegermin

CASRN: 1772578-74-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because cenegermin is a large protein molecule with a molecular weight of 13,266 and absorption from the eye is limited, the amount in milk is likely to be very low and oral absorption by the infant is unlikely because it is probably destroyed in the infant's gastrointestinal tract. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue. Ophthalmic cenegermin is not expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Cenegermin

### CAS Registry Number

1772578-74-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Nerve Growth Factors